# Treprostinil

CASRN: 81846-19-7

## Drug Levels and Effects

### Summary of Use during Lactation

The amount of treprostinil in milk appears to be low and it is not well absorbed orally. Two infants have been breastfed during maternal treprostinil therapy, one infant for one year, without any complications. However, until more data are available, treprostinil should be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. A woman with pulmonary arterial hypertension received treprostinil by continuous infusion in a dose of 30 ng/kg per minute (2,352 ng/min), for 10 days postpartum. A milk sample taken at that time contained no detectable treprostinil (<0.05 mcg/L). The milk sample was frozen at -80 degrees C, which was subsequently found to reduce the concentration of treprostinil in milk by 16 to 18%. The average maternal serum concentration at that time was 2.2 mcg/L and unaffected by freezing. Treprostinil was changed to the subcutaneous route at the same dose and at 7 weeks postpartum, the average treprostinil concentration in milk that was immediately assayed and not frozen was 1.02 mcg/L and serum the average serum level was 5.65 mcg/L.[1] Using the standard milk ingestion of 150 mL/kg daily, the relative infant dose would be 0.35%. Additionally, the oral bioavailability of treprostinil is only about 17%, for an effective RID of 0.06%.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman developed pulmonary artery hypertension and was treated with intravenous treprostinil beginning at 32 weeks of gestation and titrated up to 26 ng/kg/min. The dose was nearly doubled postpartum because of worsening symptoms. She breastfed (extent not stated) her infant for one year with no apparent drug-related problems, although there was concern for obesity at 6 months of age. The infant was healthy and developing normally at 2 years of age.[2]

A woman with pulmonary arterial hypertension initially received treprostinil by continuous infusion and then by subcutaneous injection in a dose of 30 ng/kg per minute (2,352 ng/min). She partially (extent not stated) breastfed her infant and at 7 weeks postpartum, no adverse effects were reported in her infant.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Epoprostenol, Nitric Oxide, Sildenafil

### References

1 Leary PJ, Koehn J, Barros LM, et al. Breastfeeding on treprostinil: New data, lingering questions. Eur Respir J 2025.40268507
2 Franco V, Mueller J, Daniels CJ. Is the use of remodulin safe for pregnant and breastfeeding patients with pulmonary arterial hypertension (PAH)? A case report. J Heart Lung Transplant 2012;31 (4 Suppl):S71. doi:10.1016/j.healun.2012.01.862

## Substance Identification

### Substance Name

Treprostinil

### CAS Registry Number

81846-19-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Cardiovascular Agents

Prostaglandins

Vasodilator Agents